# PrabotulinumtoxinA

CASRN: 93384-43-1

## Drug Levels and Effects

### Summary of Use during Lactation

No data exist on the medical use of prabotulinumtoxinA during breastfeeding. However, it is not detectable systemically after intramuscular use, thus excretion into breast milk is considered unlikely. The closely related drug, onabotulinumtoxinA was not detectable in the milk of two women and detectable in only minute amounts in 5 others after 40 to 92 units injected into the face. One infant was safely breastfed during maternal botulism and no botulinum toxin was detectable in the mother's milk or infant. Breastfeeding appears to protect infants against botulism.[1] No special precautions are required.

### Drug Levels

Maternal Levels. Published information on the medical use of prabotulinumtoxinA during breastfeeding was not found as of the revision date.

Type A botulinum toxin was detected in the blood and stools of a nursing mother after ingesting fermented salmon eggs. She was given 2 vials of trivalent botulism antitoxin, 1 intravenously and 1 intramuscularly. A milk sample obtained 3 days after the onset of her illness and 4 hours after administration of botulinum antitoxin had no detectable botulinum toxin nor botulism organisms.[2]

Four women undergoing cosmetic procedures were injected with doses ranging from 40 to 92 units of onabotulinumtoxinA. Milk samples were taken at baseline and 1, 3 and 5 hours after the injections. Two women had undetectable (<46 ng/L) levels in all samples after receiving 54 and 92 units. Two other women who received 40 and 46 units had peak milk levels of 422 ng/L and 747 ng/L, respectively.[3]

In a preprint, 3 women were reported who received onabotulinumtoxinA at 3 sites for facial cosmetic procedures for a total dose of 64 units. They were instructed to express 200 mL of breastmilk before treatment and 1, 6, 24, 36, 48, and 72 hours after treatment using a manual pump. In addition, milk samples were collected at 5, 6, 7, 10, and 11 days, 2 months, 4 months, and 5 months after the injections. The highest observed concentration was 33.4 ng/L in in one woman 4 days after the injection. In another woman, the highest concentration occurred 3 days after the injection. After the first week, milk concentrations in one woman decreased to a low of 6.9 ng/L at 11 days, before another peak of 26.6 ng/L at 2 months after the injections. If the highest concentration and a dose of 150 mL/kg daily breastmilk intake are used, a breastfed infant would receive a maximum of 5 ng/kg of botulinum toxin A orally per day, which is far below the dose of 12 to 25 units/kg given by injection to children with spastic cerebral palsy.[4]

Infant Levels. Type A botulinum toxin was detected in the blood and stools of a nursing mother after ingesting fermented salmon eggs. No botulinum toxin was detected in the breastfed infant's blood or stool on the day the mother was admitted to the hospital (3 days after the onset of illness) and no botulism organisms were detected in the infant's stools.[2]

### Effects in Breastfed Infants

One mother breastfed her infant while she was experiencing toxicity from botulism poisoning. She breastfed her 2-month-old infant. Although the mother died, the infant had no symptoms.[5]

A woman developed botulism after ingesting fermented salmon eggs while breastfeeding her 8-month-old breastfed (extent not stated) infant. The infant developed no signs or symptoms of botulism even though she continued to nurse throughout the mother's hospitalization.[2]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Arnon SS, Damus K, Thompson B, et al. Protective role of human milk against sudden death from infant botulism. J Pediatr 1982;100:568-73 7038077
2 Middaugh J. Botulism and breast milk. N Engl J Med 1978;298:343 622098
3 Hudson C, Wilson P, Lieberman D, et al. Analysis of breast milk samples in lactating women after undergoing botulinum toxin injections for facial rejuvenation: A pilot study. Facial Plast Surg Aesthet Med 2024 38306172
4 Gu H, Xu Z, Koviazina R, et al. Detection of nontoxic BoNT/A levels in post-facial botox injection breastmilk using a multi-technique approach. bioRxiv 2024. doi:10.1101/2024.05.22.595434
5 Douthirt C. An outbreak of botulism in Tucumcari, New Mexico. Southwest Med 1938:51-3

## Substance Identification

### Substance Name

prabotulinumtoxinA

### CAS Registry Number

93384-43-1

### Drug Class

Breastfeeding

Lactation

Milk, Human

Bacterial Toxins

Neuromuscular Agents

Neurotoxins